# Nitisinone

CASRN: 104206-65-7

## Drug Levels and Effects

### Summary of Use during Lactation

Blood levels in two exclusively breastfed infants of one mother were far below the therapeutic range and dropped from the initial postpartum measurement to levels taken during the second week of breastfeeding. The infants had no adverse reactions and grew normally. If nitisinone is required by the mother, it is not a reason to discontinue breastfeeding. Until more data are available, monitoring the breastfed infant’s blood nitisinone, tyrosine and succinylacetone concentrations might be advisable.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. A mother was taking nitisinone 40 mg daily for type-1 tyrosinemia during pregnancy and breastfeeding. The infant’s mother breastfed exclusively for 2 weeks. Two days postpartum, the infant’s blood nitisinone concentration was 10.9 micromoles/L. Because of the drug’s long half-life of 54 hours, this concentration was probably from transplacental passage. The blood level dropped to 1.7 micromoles/L at about 10 days postpartum and at 6 weeks, nitisinone was undetectable (<0.1 micromoles/L ) in the infant’s blood. A second infant of the same mother was born when the mother was taking nitisinone 80 mg daily. The infant was exclusively breastfed exclusively for 2 weeks. The infant’s blood nitisinone concentration was 5 micromoles/L on day 5 of life, 1.7 micromoles/L at about day 12 of life and undetectable on day 24 of life. All of the measured infant blood levels were far below the therapeutic reference range for infants of 30 to 60 micromoles/L.[1]

### Effects in Breastfed Infants

A patient with type-1 tyrosinemia was taking nitisinone 40 mg daily or 0.44 mg/kg daily in addition to a low tyrosine and phenylalanine diet. She continued on this regimen during her first pregnancy and postpartum. In her second pregnancy, the nitisinone dosage was increased to 60 mg daily in the week 11 of pregnancy, to 80 mg daily in the week 28 and continued at that dosage postpartum. Both infants were exclusively breastfed for 2 weeks postpartum. They showed no adverse reactions and grew normally.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Zöggeler T, Ramoser G, Höller A, et al. (2022). Nitisinone treatment during two pregnancies and breastfeeding in a woman with tyrosinemia type 1 - a case report. J Pediatr Endocrinol Metab.

## Substance Identification

### Substance Name

Nitisinone

### CAS Registry Number

104206-65-7

### Drug Class

Breast Feeding

Lactation

Enzyme Inhibitors